# Phosphorus P 32

CASRN: 14596-37-3

## Drug Levels and Effects

### Summary of Use during Lactation

Information in this record refers to the use of phosphorus P 32 as a therapeutic agent. No information is available on the use of phosphorus P 32 during breastfeeding. Use of phosphate P 32 as a skin patch to treat skin cancers poses no risk to breastfed infants after removal of the patch from the mother's skin

### Drug Levels

Phosphorus P 32 decays by beta emission with an energy of 1.709 MeV and a half-life of 14.3 days.[1]

### Effects in Breastfed Infants

Relevant published information was not found as of the revision date.

### Effects on Lactation and Breastmilk

Relevant published information was not found as of the revision date.

### References

1 Mountford PJ, Wells CP, Hall FM, et al. (1984). Potential radiation dose to a breast-fed infant following administration of sodium 32P-phosphate to the mother. Nucl Med Commun.

## Substance Identification

### Substance Name

Phosphorus P 32

### CAS Registry Number

14596-37-3

### Drug Class

Breast Feeding

Lactation

Radiopharmaceuticals

Phosphorus Radioisotopes